# Hibiscus

## Drug Levels and Effects

### Summary of Use during Lactation

Hibiscus (Hibiscus sabdariffa) flowers contain anthocyanins, proanthocyanidins, flavonols, as well as various pigments, oils and acids. Other Hibiscus species are also used medicinally. Hibiscus is purportedly used as a galactogogue in some cultures and is included in some proprietary mixtures promoted to increase milk supply;[1-3] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] No data exist on the excretion of any components of Hibiscus into breastmilk or on the safety and efficacy of Hibiscus nursing mothers or infants. Hibiscus is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Hibiscus flowers appear to be generally well tolerated, although allergic reactions are possible, including cross reaction with other members of the Malvaceae family (e.g., ambrette, marshmallow).

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Sixty-six postpartum mothers (22 in each of 3 groups) with no concurrent illnesses were randomly assigned to receive an herbal tea, placebo, or nothing after delivering healthy, fullterm infants. Mothers in the herbal tea group received at least 3 cups daily of 200 mL of Still Tea (Humana-Istanbul, Türkiye; containing Hibiscus 2.6 grams, fennel extract 200 mg, fennel oil 20 mg, rooibos 200 mg, verbena [vervain] 200 mg, raspberry leaves 200 mg, fenugreek 100 mg, goat's rue 100 mg, and, vitamin C 500 mg per 100 grams, per manufacturer's web site November 2011). A similar-looking apple tea was used as the placebo. All women were followed by the same nurse and pediatrician who were blinded to what treatment the mothers received. Mothers who received the Still Tea produced more breastmilk with an electric breast pump on the third day postpartum than mothers in the other groups. The infants in the Still Tea group had a lower maximum weight loss, and they regained their birth weights sooner than those in the placebo or no treatment arms. No long-term outcome data were collected. Because many of the ingredients in Still Tea are purported galactogogues, including Hibiscus, no single ingredient can be considered solely responsible for the tea's effects, although the authors attributed the action to fenugreek.[6]

An herbal tea containing Hibiscus, fenugreek, fennel, rooibos, vervain, raspberry, goat's rue, and vitamin C (Humana Still-Tee, Humana GmbH, Herford, Germany) or water was randomly given to nursing mothers in a dosage of 3 cups daily beginning on the day of delivery. Several markers of antioxidant capacity were measured in breastmilk on day 1 and again after 7 to 10 days. No difference was found in the markers between mothers who received the tea and the water.[7]

### References

1 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38–9.16320878
2 Da-Costa-Rocha I, Bonnlaender B, Sievers H, et al. Hibiscus sabdariffa L. - A phytochemical and pharmacological review. Food Chem 2014;165:424–43.25038696
3 Ali Z, Bukari M, Mwinisonaam A, et al. Special foods and local herbs used to enhance breastmilk production in Ghana: Rate of use and beliefs of efficacy. Int Breastfeed J 2020;15:96.33198765
4 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
5 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
6 Turkyılmaz C, Onal E, Hirfanoglu IM, et al. The effect of galactagogue herbal tea on breast milk production and short-term catch-up of birth weight in the first week of life. J Altern Complement Med 2011;17:139–42.21261516
7 Kavurt S, Bas AY, Yucel H, et al. The effect of galactagogue herbal tea on oxidant and anti-oxidant status of human milk. J Matern Fetal Neonatal Med 2013;26:1048–51.23363373

## Substance Identification

### Substance Name

Hibiscus

### Scientific Name

Hibiscus sabdariffa

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal